# Carperitide

CASRN: 89213-87-6

## Drug Levels and Effects

### Summary of Use during Lactation

Carperitide is not approved for marketing in the United States by the U.S. Food and Drug Administration (FDA) but is available in Japan and possibly other countries. It is a synthetic version of atrial natriuretic peptide (ANP), which is a normal component of human milk. Carperitide was no higher than normal in the milk of two women who received it during lactation. If a mother requires carperitide, it is not a reason to discontinue breastfeeding

### Drug Levels

Maternal Levels. A woman developed pulmonary embolism with pulmonary edema after an emergency cesarean section. On hospital day 4, a continuous intravenous infusion of carperitide 0.025 mcg/kg/min was initiated; it was discontinued on hospital day 5. The breastmilk ANP concentration on day 4 of hospitalization was 0.31 mcg/L. On day 13 (during the non-administration period), the breastmilk concentration was 0.76 mcg/L. A second woman was diagnosed with acute heart failure 6 days postpartum. Treatment included a continuous intravenous infusion of carperitide 0.05 mcg/kg/min. The ANC in breastmilk on day 8 was 1.27 mcg/L and the mean concentration was 1.68 mcg/L during the administration period. During the non-administration period (days 9, 12, and post-discharge), the mean milk ANP concentration was 1.56 mcg/L. In both cases, the ANC concentrations in milk during therapy did not exceed the milk concentrations when the patients were not receiving the drug. When the authors assumed that all ANC in milk came from carperitide, the RIDs were 0.24% and 0.19% to 0.53% for cases 1 and 2, respectively.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Ogawa Y, Kamiya T, Tagawa N, et al. Measurement of atrial natriuretic peptide (ANP) concentrations in human breast milk and maternal plasma during carperitide therapy (two case reports). J Hum Lact 2026:8903344261451984.42311077

## Substance Identification

### Substance Name

Carperitide

### CAS Registry Number

89213-87-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Atrial Natriuretic Factor

Cardiovascular Agents